# Coriander

CASRN: 84775-50-8

## Drug Levels and Effects

### Summary of Use during Lactation

Coriander (Coriandrum sativum) seeds contain a volatile oil, consisting mainly of linalool, which is responsible for its odor and taste. It also contains 1,8-cineole (eucalyptol). Coriander is a purported galactogogue, and has been included in some mixtures promoted to increase milk supply;[1,2] however, no scientifically valid clinical trials support this use. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[1,3] Coriander is "generally recognized as safe" (GRAS) as a food by the U.S. Food and Drug Administration. However, allergic reactions and photosensitivity have been reported and it can cause contact dermatitis. One case of excessive use possibly caused endocrine disruption in a nursing mother. A woman nursing her 10-month-old infant had drunk 200 mL of about a 10% aqueous extract of Coriandrum sativa (method of verification and possible presence of contaminants not stated) daily for 7 consecutive days to enhance her milk supply when she was admitted to the hospital with severe diarrhea and stomach pain. The patient had no abnormal serum or urine tests and recovered with palliative therapy. Fifteen days later the patient was complaining of skin darkness, depressed mood, a loss of body fluids, and amenorrhea, which was diagnosed as an adrenal dysfunction. The patient said that she did not have any history of such a condition. She was treated with adrenocorticoids and an oral contraceptive. She was well and healthy 10 days later.[2] Elevated liver enzymes occurred in a woman taking Mother's Milk Tea, which contains coriander.[4]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Twelve nursing mothers who were19 weeks to 19 months postpartum ingested 100 mg of 1,8 cineole (eucalyptol) in the form of delayed-release capsules (Soledum-Klosterfrau Vertriebs GmbH, Germany) that release the drug in the intestine. Then they pumped 1 to 4 milk samples at the time they perceived the smell of eucalyptus on their breath which had been previously shown to be approximately concurrent. A total of 21 milk samples were obtained. Odor was rated by a panel of 3 to 5 experts as either smelling like eucalyptus or not. Fourteen of the samples had a distinct eucalyptus-like odor. Chemical analysis of the positive odor tests found 1,8-cineole in concentrations from 70 to about 2090 mcg/kg of milk, most in the range of 100 to 500 mcg/kg of milk. Samples with negative odor tests contained concentrations in the range of 0.98 to about 20.23 mcg/kg of milk. In one woman who donated 3 samples, the highest concentration of 71 mcg/kg occurred at 1.5 hours after ingestion, with concentrations of 1 mcg/kg before ingestion and 15 mcg/kg at 9.5 hours after ingestion.[5]

Eight women had their milk analyzed for 1,8-cineole metabolites. Ten metabolites and several enantiomers of these metabolites were detected.[6,7]

Eighteen nursing mothers who were nursing their infants of 8 to 53 weeks of age were served a curry dish that contained an average of 34.6 mg of linalool. Baseline linalool concentrations in milk averaged 0.22 mcg/L (range 0 to 1.1 mcg/L). Milk samples contained linalool in concentrations of 0.12 to 15.24 mcg/L at 1 hour after eating, 0.03 to 6.44 mcg/L at 2 hours after eating and 0.01 to 3.73 mcg/L at 3 hours after eating. In the same study, the curry dish contained an average of 394 mcg of 1,8-cineole. Baseline 1,8-cineole concentrations in milk averaged 1.44 mcg/L (range 0.07 to 7.57 mcg/L). Milk samples contained 1,8-cineole in concentrations of 0.19 to 7.41 mcg/L at 1 hour after eating, 0.33 to 7.86 mcg/L at 2 hours after eating and 0.22 to 3.33 mcg/L at 3 hours after eating.[8]

Twenty nursing mothers who were nursing their infants with a mean of 25 weeks of age were served a standardized curry dish that contained an average of 35 mg of linalool and 400 mcg of 1,8-cineole. Mothers donated one milk sample each before and 1, 2, 3, 4, 5, 6, and 8 h after the eating the curry dish. Linalool reached its maximum concentration in milk after 1 hour in eleven participants, after 2 hours in six, after 3 hours in two participants, while in one participant, the maximum was not clearly determinable. Peak milk linalool concentrations ranged from 4.13 to 18.91 mcg/L. Linalool concentrations averaged 40% higher after milk samples were treated with beta-glucuronidase, indicating transfer of conjugated linalool into milk. 1,8-Cineole reached its maximum concentration in milk after 1 hour in three participants, after 2 hours in four participants, after 3 hours in three participants, after 4 hours in three participants after 5 hours in three participants, after 6 hours in three participants and after 8 hours in one participant. Peak milk 1,8-cineole concentrations ranged from 0.98 to 10.1 mcg/L.[9]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Nursing mothers who were participating in an experiment on the excretion of 1,8-cineole (eucalyptol) in breastmilk took a 100 mg capsule of 1,8-cineole orally. Although instructed not to, 12 mothers breastfed their infants during the experiment. Mothers reported that none of their infants refused their milk or breastfed less than usual. Two mothers felt that their infants were more agitated a few hours after breastfeeding. A third mother reported that the infant stopped nursing from time to time and "looked puzzled", but resumed nursing. Upon repeating the experiment 6 weeks later, the infant did not react in an unusual way during breastfeeding.[5]

A small manufacturer-sponsored, double-blind, randomized study compared Mother's Milk tea (Traditional Medicinals, Sebastopol, CA) to lemon verbena tea in exclusively breastfeeding mothers with milk insufficiency. Each Mother's Milk tea bag contained 210 mg of coriander fruit as well as several other herbs. Mothers were instructed to drink 3 to 5 cups of tea daily. No differences were seen between groups in infant digestive, respiratory, dermatological, and other maternal-reported adverse events. No differences were seen in the growth parameters of the breastfed infants between the two groups.[10]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307-14.29902083
2 Zabihi E, Abdollahi M. Endocrinotoxicity induced by Coriandrum sativa: A case report. WHO Drug Inf 2002;16:15.
3 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42-e53.33481531
4 Silverman AL, Kumar A, Borum ML. Re: "Herbal use during breastfeeding" by Anderson (Breastfeed Med 2017;12(9):507-509). Breastfeed Med 2018;13:301.29757695
5 Kirsch F, Beauchamp J, Buettner A. Time-dependent aroma changes in breast milk after oral intake of a pharmacological preparation containing 1,8-cineole. Clin Nutr 2012;31:682-92.22405404
6 Kirsch F, Buettner A. Characterisation of the metabolites of 1,8-cineole transferred into human milk: Concentrations and ratio of enantiomers. Metabolites 2013;3:47-71.24957890
7 Kirsch F, Horst K, Rohrig W, et al. Tracing metabolite profiles in human milk: Studies on the odorant 1,8-cineole transferred into breast milk after oral intake. Metabolomics 2013;3:47-71. doi:10.1007/s11306-012-0466-9
8 Debong MW, N'Diaye K, Owsienko D, et al. Dietary linalool is transferred into the milk of nursing mothers. Mol Nutr Food Res 2021;65:e2100507.34658145
9 Debong MW, Homm I, Gigl M, et al. Curry-odorants and their metabolites transfer into human milk and urine. Mol Nutr Food Res 2024;68:e2300831.38602198
10 Wagner CL, Boan AD, Marzolf A, et al. The safety of Mother's Milk(R) Tea: Results of a randomized double-blind, controlled study in fully breastfeeding mothers and their infants. J Hum Lact 2019;35:248–60.30005170

## Substance Identification

### Substance Name

Coriander

### Scientific Name

Coriandrum sativum

### CAS Registry Number

84775-50-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Food

Galactogogues

Phytotherapy

Plants, Medicinal